# Ofatumumab

CASRN: 679818-59-8

## Drug Levels and Effects

### Summary of Use during Lactation

Information on the clinical use of ofatumumab during breastfeeding indicates that the drug has no effect on the immunity or growth of breastfed infants. The amounts in milk are extremely low. It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[1] Ofatumumab is considered to be acceptable to use during breastfeeding.[2-6] Breastfeeding can resume after the injection; however, waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[7]

### Drug Levels

Maternal Levels. Twelve mothers (11 received a loading dose) who were receiving ofatumumab for multiple sclerosis collected milk before treatment initiation, before the next ofatumumab dose, and 24 hours after a dose at weeks 4, 8, and 12 of therapy. Additional samples were taken at either 16 days after the dose at weeks 4, 8, and 12 and 7 hours after a dose at week 12, or at 8 and 15 days after a dose at weeks 4, 8, and 12. Mothers collected between 7 and 15 milk samples. Of the 141 samples collected after ofatumumab initiation, 30.5% had a concentration below the quantification limit of 1.5 mcg/L. The median time to the peak concentration was 37 days (range 14 to 107 days) after ofatumumab treatment initiation, during which 2 to 6 ofatumumab doses were given. Milk concentration were between the quantification limit and 56.3 mcg/L, with large inter- and intra-individual variations. The average milk concentration was 4.5 mcg/L (range 2 to 12 mcg/L) and the average infant dose was 0.68 (range 0.26 to 1.77) mcg/kg daily.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A report from the German multiple sclerosis registry found 2 infants who were breastfed (extent not stated) during ofatumumab use. No effect on the B-cell count of the infants was noted.[8,9]

In a prospective cohort study, 12 women with multiple sclerosis and their breastfed infants were followed after starting ofatumumab between 0.6 and 19.6 months (median 3.9 months) postpartum. They breastfed (8 exclusively) for a median of 9.6 months (range 1.8 to 23.8 months) while taking ofatumumab. The infants were followed for a median of 23.6 months (range 12.2 to 27.0 months) postpartum. No infants had developmental delays. Ten had at least one typical childhood infection after initiation of ofatumumab, including respiratory infections, COVID-19, and hand, foot, and mouth disease. Two infants were hospitalized for respiratory syncytial virus (RSV) and bronchitis. Eight infants received live vaccines, two against RSV and eight against measles-mumps-rubella-varicella. No adverse reactions were reported after the vaccinations. None of five infants with B-cell counts taken during exposure, had counts below the lower limit of normal.[3]

A follow-up study of 3 infants who were breastfed during maternal ofatumumab therapy for multiple sclerosis found no development delays over with observation period up to one year.[10] The amount of breastfeeding and other details were not provided in the abstract.

A prospective single-center cohort study of infants, born in 2013 to 2022 were followed up at 6 to 36 months postpartum via telephone interviews. One hundred eighty-three infants who were breastfed during maternal monoclonal antibody therapy for multiple sclerosis or neuromyelitis optica spectrum disorder were matched to infants of disease-modifying therapy-naïve mothers. No differences were found in developmental delay, systemic antibiotic use, severe infections, or hospitalizations. Of the 183 infants, 10 were exposed to ofatumumab.[5]

A retrospective chart review found one term breastfed infant of a multiple sclerosis patient who received ofatumumab while breastfeeding (extent not stated). Ofatumumab was reinitiated 21.4 weeks postpartum. The infant had blood drawn 2 weeks after maternal drug initiation. The infant had a CD19 count within the normal range for age.[11]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon beta, Methylprednisolone, Natalizumab, Ocrelizumab, Peginterferon beta

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
2 Dobson R, Rog D, Ovadia C, . Anti-CD20 therapies in pregnancy and breast feeding: A review and ABN guidelines. Pract Neurol 2022;23:6-14.35803727
3 Witt L, Dost-Kovalsky K, Friedmann N, . Ofatumumab-exposed breastfeeding in multiple sclerosis patients. Mult Scler 2025;31:338-51.39757874
4 Shipley J, Beharry J, Yeh W, . Consensus recommendations on multiple sclerosis management in Australia and New Zealand: Part 2. Med J Aust 2025;222:365-71.39923190
5 Witt L, Friedmann N, Haben S, . Safety of breastfeeding under monoclonal antibodies in the offspring of mothers with multiple sclerosis or neuromyelitis optica spectrum disorder. J Neurol Neurosurg Psychiatry 2026;97:522-31.41760394
6 Mullan G, Ford HL, Blackall P, . UK consensus on pregnancy in multiple sclerosis: An update to ‘Association of British Neurologists’ guidance. Mult Scler 2026;32:885-96.42397849
7 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
8 Schwake C, Steinle J, Thiel S, . Effects of anti-CD20 therapies on infant health and physiological B-cell development if administered before or during pregnancy and/or lactation. Mult Scler J 2022;28 (3 Suppl):29-30. doi:10.1177/13524585221123
9 Schwake C, Steinle J, Thiel S, . Neonatal B-cell levels and infant health in newborns potentially exposed to anti-CD20 monoclonal antibodies during pregnancy or lactation. Neurol Neuroimmunol Neuroinflamm 2024;11:e200264.38870458
10 Camilli F, Carrozzo G, Bandini A, . Maternal and neonatal outcomes of natalizumab and anti-CD20 monoclonal antibody exposure during pregnancy and lactation in multiple sclerosis. Mult Scler J 2025;31 (3 Suppl):1363-4. doi:10.1177/13524585251370543
11 Shah A, Alvarez E. Absence of significant hematologic abnormalities in breastfed infants of mothers with multiple sclerosis treated with anti-CD20 therapies. Mult Scler J Exp Transl Clin 2026;12:20552173261454808.42226810

## Substance Identification

### Substance Name

Ofatumumab

### CAS Registry Number

679818-59-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized

Antineoplastic Agents